# Oveporexton

CASRN: 2460722-04-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of oveporexton during breastfeeding. Because oveporexton is more than 96% bound to plasma proteins, the amount in milk is likely to be low. If a mother requires oveporexton, it is not a reason to discontinue breastfeeding. However, until more safety data become available, an alternate drug may be preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Narcolepsy) Amphetamine, Armodafinil, Dextroamphetamine, Lisdexamfetamine, Methylphenidate, Modafinil, Oxybate Salts, Pitolisant

## Substance Identification

### Substance Name

Oveporexton

### CAS Registry Number

2460722-04-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

GABA Modulators